# Lormetazepam

CASRN: 848-75-9

## Drug Levels and Effects

### Summary of Use during Lactation

Lormetazepam is not approved for marketing in the United States by the U.S. Food and Drug Administration. Lormetazepam has low levels in breastmilk and a short half-life relative to many other benzodiazepines. Limited evidence from nursing mothers indicates that lorazepam does not cause any adverse effects in breastfed infants with usual maternal dosages. Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Five women who were 2 to 3 days postpartum took 2 mg of lormetazepam daily at 8 pm for 10 days. Milk samples were taken just before the dose and 12 hours later. Lormetazepam milk levels were mostly undetectable (<0.2 mcg/L). The authors estimated that a fully breastfed infant would receive about 300 ng daily of lormetazepam plus its glucuronide metabolite. This amount equates to about 0.35% of the maternal dose.[1]

A woman who was 4 weeks postpartum was taking lormetazepam 2 mg once daily at 10 pm as well as lorazepam 2.5 mg 1 to 3 times daily. On day 5 at 4 pm, after 4 doses of lormetazepam, her milk lormetazepam level was 5.3 mcg/L. She did not take lormetazepam on days 5 or 6. On day 6 at 8 am her milk lormetazepam level was 1.7 mcg/L, and on day 7 it was undetectable (<0.016 mcg/L) at 10 am and 2:30 pm.[2]

Infant Levels. Five women who were 2 to 3 days postpartum took 2 mg of lormetazepam daily at 8 pm for 10 days and fully breastfed their infants. Blood samples were taken at 1.5, 5.5 and 9.5 days after the mothers first dose of lormetazepam. No free lormetazepam was detectable in the plasma of any of the infants. Average lormetazepam glucuronide levels in infant plasma were 0.6 mcg/L on day 1.5, 0.45 mcg/L on day 5.5, and 0.3 mcg/L on day 10.[1]

### Effects in Breastfed Infants

Five women who were 2 to 3 days postpartum took 2 mg of lormetazepam daily at 8 pm for 10 days and fully breastfed their infants. The authors of the study noted no pharmacological or adverse effects in any of the infants during the study.[1]

### Alternate Drugs to Consider

Lorazepam, Oxazepam, Temazepam

### References

1 Hümpel M, Stoppelli I, Milia S, et al. Pharmacokinetics and biotransformation of the new benzodiazepine, lormetazepam, in man. III. Repeated administration and transfer to neonates via breast milk. Eur J Clin Pharmacol 1982;21:421-5.6122580
2 Lemmer P, Schneider S, Muhe A, et al. Quantification of lorazepam and lormetazepam in human breast milk using GC-MS in the negative chemical ionization mode. J Anal Toxicol 2007;31:224-6.17555647

## Substance Identification

### Substance Name

Lormetazepam

### CAS Registry Number

848-75-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines